# Cyclopentolate

CASRN: 512-15-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of cyclopentolate during breastfeeding. Anticholinergic drugs might interfere with breastfeeding. A single dose of ophthalmic cyclopentolate is not likely to interfere with breastfeeding; however, during long-term use, observe the infant for signs of decreased lactation (e.g., insatiety, poor weight gain). To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[1-5] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
2 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
3 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
4 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
5 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.
6 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.

## Substance Identification

### Substance Name

Cyclopentolate

### CAS Registry Number

512-15-2

### Drug Class

Breast Feeding

Lactation

Mydriatics

Muscarinic Antagonists

Parasympatholytics